# Acesulfame

CASRN: 33665-90-6

## Drug Levels and Effects

### Summary of Use during Lactation

Acesulfame has been found in variable concentrations in the breastmilk of nursing mothers who report consuming artificially sweetened beverages and sweetener packets in the past 24 hours. Even some mothers who reported not consuming artificial sweeteners have small amounts of acesulfame in their breastmilk. However, it is not likely to reach an intake greater than the acceptable daily intake for infants.[1] Ingestion of diet drinks containing low-calorie sweeteners might increase the risk of vomiting in breastfed infants. Some authors suggest that women may wish to limit the consumption of nonnutritive sweeteners while breastfeeding because their effect on the nursing infants are unknown.[2,3]

### Drug Levels

Maternal Levels. Twenty lactating women completed background questionnaires about breastfeeding and the intake of nonnutritive sweeteners in the prior 24 hours. Each then donated a milk sample that was analyzed for the presence of nonnutritive sweeteners. Sweetener intake was primarily from diet sodas and sweetener packets. Of the 14 women who reported intake of a nonnutritive sweetener, 9 had acesulfame detectable in their breastmilk in concentrations ranging from 0.01 to 2.22 mg/L. In addition, 4 of the 6 women reporting no nonnutritive sweetener intake also had milk acesulfame levels ranging from 0.02 to 0.09 mg/L, probably from hidden sources in food.[2]

Thirty-four women, 14 with normal weight and 20 with obesity, ingested 12 fluidounces of a caffeine-free diet cola containing 68 mg of sucralose and 41 mg acesulfame potassium after an overnight fast prior to breakfast. Breastmilk samples were taken from the same breast every hour for 6 hours. Acesulfame was detectable in breastmilk at baseline before the soda in 18% of women. Peak acesulfame concentrations in breastmilk ranged from 299 to 4764 mcg/L, with one woman having the very high concentration; the median peak concentrations was 945 mcg/L. Acesulfame first appeared in breastmilk 2 hours after ingestion and the peak acesulfame concentration in breastmilk occurred at about 4 hours for all but the outlier, who had a peak concentration at 1 hour after ingestion.[4]

Forty-nine women consumed a beverage containing 85 mg of acesulfame potassium. Normal and overweight women were about equally represented in the sample. Breastmilk samples were collected before the beverage and at 30, 60, 120, 180, 240, 300, and 360 minutes after the beverage. The average peak milk level in 46 of the women was 936 mcg/L and it occurred at 4 hours after the beverage.[5]

Forty exclusively breastfeeding mothers drank 20 fluidounces of diet cranberry juice drink that contained 17 mg of acesulfame potassium. Foremilk was collected 1, 2, 3, 4, 6, 8 and 12 hours after diet beverage ingestion. The average peak milk level of acesulfame was 373 mcg/L and occurred at a median of 4 hours (range 2 to 8 hours) after the dose. The milk concentration fell with an average half-life of 3.5 hours. The average relative infant dose was 1.6%.[6]

Infant Levels. Forty exclusively breastfeeding mothers drank 20 fluidounces of diet cranberry juice drink that contained 17 mg of acesulfame potassium. One blood sample was collected from each of their infants at various times between 1.5 and 14 hours after the maternal ingestion of acesulfame. Acesulfame was detected in the plasma of all infants at an average concentration of 9.2 mcg/L.[6]

### Effects in Breastfed Infants

A cross-sectional survey assessed the dietary history of US mothers nursing infants between 11 and 15 weeks of age. The survey was used to estimate the amount of diet soda and fruit drinks consumed by the women. There were no statistically significant differences in infants’ weight or z-scores based on low calorie sweetener exposure. However, infants exposed to low calorie sweetener in milk once or less per week had a statistically significantly higher risk of vomiting than those who were not exposed. Greater exposure was not associated with vomiting. It was not possible to assess the effects of specific sweeteners.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aspartame

### References

1 Bailón Uriza R, Ayala Méndez JA, Cavagnari BM, et al. Non-caloric sweeteners in women of reproductive age - A consensus document. Nutr Hosp 2020;37:211-22.31960692
2 Sylvetsky AC, Gardner AL, Bauman V, et al. Nonnutritive sweeteners in breast milk. J Toxicol Environ Health A 2015;78:1029-32.26267522
3 Rother KI, Sylvetsky AC, Schiffman SS. Non-nutritive sweeteners in breast milk: Perspective on potential implications of recent findings. Arch Toxicol 2015;89:2169-71.26462668
4 Rother KI, Sylvetsky AC, Walter PJ, et al. Pharmacokinetics of sucralose and acesulfame-potassium in breast milk following ingestion of diet soda. J Pediatr Gastroenterol Nutr 2018;66:466-70.29077645
5 Stampe S, Leth-Møller M, Greibe E, et al. Artificial sweeteners in breast milk: A clinical investigation with a kinetic perspective. Nutrients 2022;14:2635.35807817
6 Sylvetsky AC, Kuttamperoor JT, Langevin B, et al. Intergenerational transmission of sucralose and acesulfame-potassium from mothers to their infants via human milk: a pharmacokinetic study. Am J Clin Nutr 2024;120:846–53.39111550
7 Huang Q, Murphy J, Smith ER, et al. Diet beverage intake during lactation and associations with infant outcomes in the infant feeding practices study II. Nutrients 2021;13:3154.34579031

## Substance Identification

### Substance Name

Acesulfame

### CAS Registry Number

33665-90-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Artificial Sweeteners

Sweetening Agents